# Somatrem

CASRN: 82030-87-3

## Drug Levels and Effects

### Summary of Use during Lactation

Because somatrem is poorly absorbed orally, it is not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants. However, there is no published experience with somatrem during breastfeeding, so an alternate drug may be preferred, especially while nursing a newborn or preterm infant. The closely related recombinant human growth hormone, somatropin, has been reported to increase milk production.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A study in 30 pregnant women found that the mean maternal serum growth hormone level progressively increased from an average of 0.2 mIU/L at 36 weeks’ gestation to a peak value of 0.9 mIU/L on postpartum day 3, with levels decreasing to 0.2 mIU/L by postpartum day 4. In vitro studies found that growth hormone increases the metabolism of mammary epithelial cells by increasing mitochondrial activity.[1]

### Alternate Drugs to Consider

Somatropin

### References

1 Elajnaf T, Rostom H, Meng X, et al. Serum growth hormone increases at the onset of lactation and promotes mitochondrial activity in human mammary cells. J Endocr Soc 2023;7:A605. doi:10.1210/jendso/bvad114.1132

## Substance Identification

### Substance Name

Somatrem

### CAS Registry Number

82030-87-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Galactogogues

Human Growth Hormone